# Mefloquine

CASRN: 53230-10-7

## Drug Levels and Effects

### Summary of Use during Lactation

Very small amounts of mefloquine are excreted in breastmilk; the amount of drug is not sufficient to harm the infant nor is the quantity sufficient to protect the child from malaria. Breastfeeding infants should receive the recommended dosages of mefloquine.[1]

### Drug Levels

Maternal Levels. Two women who were 2 to 3 days postpartum were given mefloquine 250 mg orally. In one woman who provided milk samples periodically for 56 days, the milk mefloquine level declined from 53 to 32 mcg/L over this period. The average half-life in breastmilk for the 2 women was 16.6 days. The authors estimated that an exclusively breastfed infant would receive an average of 3.8% of the maternal weight-adjusted dosage of mefloquine after a single dose. However, this value could be higher with weekly doses because of accumulation.[2]

A physiologically based pharmacokinetic model has been developed that adequately predicts mefloquine excretion into breastmilk.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Atovaquone and Proguanil, Doxycycline, Chloroquine

### References

1 Malaria. In: Centers for Disease Control and Prevention. CDC Yellow Book 2024: Health Information for International Travel. 2024. https://wwwnc.cdc.gov/travel/yellowbook/2024/infections-diseases/malaria#treatment
2 Edstein MD, Veenendaal JR, Hyslop R. Excretion of mefloquine in human breast milk. Chemotherapy 1988;34:165-9.3262044
3 Almond LM, Abduljalil K, Pansari A, et al. PBPK-led assessment of antimalarial drug concentrations in breastmilk: A strategy for optimal use of prediction methods to guide decision making in an understudied population. CPT Pharmacometrics Syst Pharmacol 2025;14:738–50.39930940

## Substance Identification

### Substance Name

Mefloquine

### CAS Registry Number

53230-10-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antimalarials

Antiparasitic Agents

Antiprotozoal Agents